# Fava Beans

## Drug Levels and Effects

### Summary of Use during Lactation

Fava beans (Vicia faba) contain the compounds vicine and convicine. These chemicals are metabolized to divicine and isouramil, which are potent oxidizing agents. In persons with glucose-6-phosphate dehydrogenase (G6PD) deficiency, these compounds cause hemolysis by disrupting the red cell wall. Many cases of hemolysis, and subsequent hyperbilirubinemia have been reported in breastfed infants after maternal fava bean intake. Most of the cases have been reported from around the Mediterranean and Middle East or in infants whose heritage was from this region. The prevalence of G6PD deficiency is relatively high in this geographic area, where perhaps more susceptible variants occur-at least 14 variants of G6PD deficiency are known. Most reports are of male infants, but some female infants have been affected. Favism via breastmilk can be quite severe. One breastfed infant developed renal cortical necrosis following maternal fava bean ingestion. The infant died of renal failure in the hospital 10 days after maternal fava bean ingestion. Mothers nursing a G6PD deficient infant should not consume fava beans.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a review of 67 cases of favism over a 3-year period by a physician in Cyprus, 2 of the cases were breastfed infants, aged 5 and 9 months. Their mothers reported eating fava beans, but not feeding any beans to their infants.[1]

A 6-month-old Yemenite infant who was primarily breastfed with supplements of wheat flower became ill 2 days after his mother ate fava beans. He became pale, vomited and passed red urine. Urine output then ceased. On the day after admission to the hospital, he became semi-comatose with a BUN of 276 mg/dL and the next day he became comatose and died. Bilateral renal cortical necrosis was determined to be the cause of the infant's death.[2]

A 4-month-old Israeli infant who was breastfed with supplementary cereals became ill after her mother ate fava beans. A day after fava bean ingestion, the infant's skin turned yellow. On admission, the infant's urine was dark and had elevated urobilinogen content. Reduced red cell glutathione was also found. After two transfusions, the infant recovered and six weeks later was shown to have G6PD deficiency. Both parents were probable carriers of the gene defect, but neither were affected.[3]

Five hundred six children under 15 years of age were admitted to a Greek hospital over an 11-year period with signs of favism. Twenty-eight patients were less than 12 months of age. Of these, 18 were breastfed and developed symptoms 2 to 6 days after maternal ingestion of fava beans. Overall, the male to female ratio of the patients was 6.2 and the highest frequency of attacks was in May when fava beans ripened.[4]

A 22-year-old Greek woman had a hemolytic event after eating in a Mexican restaurant in Nuremburg, Germany. Laboratory examination found that she was heterozygous for G6PD deficiency (3.1 units/gram of hemoglobin). Her father, mother and sister were also found to be heterozygous for G6PD deficiency. As a neonate, she reportedly suffered hemolysis and kidney failure while breastfeeding after her mother ate fava beans.[5]

Four exclusively breastfed male Arab infants developed favism after their mothers ingested fava beans. They ranged in age from 2 to 4 months and developed excessive pallor 2 to 3 days after maternal ingestion of fava beans. Their urine was deep orange in color, severe acute hemolytic anemia was diagnosed and all were shown to be G6PD deficient.[6]

Two exclusively breastfed Israeli infants, one male and one female, developed phototherapy-resistant jaundice after maternal ingestion of fava beans. Both infants were the children of Sephardic Jewish parents. The girl developed the condition at 2 days of age and the mother admitted eating fava beans on several occasions on the days leading up to delivery. The male infant was found to have elevated bilirubin at 36 hours of age. The infant's mother had consumed fava beans for several days before delivery, despite knowing that she was G6PD deficient. Passage of the hemolytic agent via the placenta cannot be ruled out.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Joannides CC. Favism in Cyprus: Analysis of 67 cases admitted to Nicosia General Hospital during the last 3 years. Cyprus Med J 1952;5:795-9.14926361
2 Casper J, Shulman J. Bilateral cortical necrosis of the kidneys in an infant with favism. Am J Clin Pathol 1956;26:42-7.13292383
3 Emanuel B, Schoenfeld A. Favism in a nursing infant. J Pediatr 1961;58:263-6.13726584
4 Kattamis CA, Kyriazakou M, Chaidas S. Favism: Clinical and biochemical data. J Med Genet 1969;6:34-41.5771221
5 Kautek L, Solem E, Böhler H. Hämolytische krise nach stillen! der kinderarzt Der Kinderarzt 1988;19:808.
6 Taj-Eldin S. Favism in breast-fed infants. Arch Dis Child 1971;46:121-3.5555486
7 Kaplan M, Vreman HJ, Hammerman C, et al. Favism by proxy in nursing glucose-6-phosphate dehydrogenase-deficient neonates. J Perinatol 1998;18 (6 Pt 1):477-9.9848766

## Substance Identification

### Substance Name

Fava Beans

### Scientific Name

Vicia faba

### Drug Class

Breast Feeding

Lactation

Milk, Human

Foodborne Diseases

Poisoning

Anemia, Hemolytic

Glucosephosphate Dehydrogenase Deficiency